# Methylprednisolone

CASRN: 83-43-2

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of methylprednisolone in breastmilk are very low and no adverse reactions in breastfed infants have been reported, even with intravenous doses of 1 gram. With maternal intravenous doses of 1 gram, fully breastfed infants would receive doses less than their daily cortisol output, and much less than the therapeutic dose used in neonates.[1,2] Accumulation of the drug does not occur in breastmilk with consecutive daily doses of 1 gram. Avoiding breastfeeding during the infusion and for as little as 2 hours after a 1 gram intravenous dose markedly reduces infant exposure. Smaller oral doses and local injections, such as for tendinitis, require no special precautions. Medium to large doses of corticosteroids given systemically or injected into joints or the breast have been reported to cause temporary reduction of lactation.

### Drug Levels

Maternal Levels. In one woman taking 6 mg daily of methylprednisolone by mouth, 2 peak milk levels occurred: one at 2 hours after the dose and another 8 hours after the dose. Peaks were about 7 mcg/L, while levels fell to about 2.5 mcg/L 6 hours after the dose and to about 1 mcg/L 10 hours after the dose.[3]

A woman with multiple sclerosis had a relapse in the first 3 months postpartum. She was given intravenous methylprednisolone 1 gram daily for 3 days. Milk samples were obtained after one of the doses. The breastmilk methylprednisolone was 3 mg/L immediately after the dose and 1.2 mg/L at 4 hours after the dose. The authors estimated that an infant who nurses at 4 hours after a dose will ingest 0.168 mg of methylprednisolone which is equivalent of 0.84 mg of cortisol or 42% of the daily output. An infant who nurses starting at 8 hours after a dose will ingest 0.048 mg of methylprednisolone which is equivalent to 12% of daily cortisol production. The authors did not specify their method of calculating these values.[4]

A woman with multiple sclerosis who was 5 months postpartum received 1 gram of methylprednisolone infused intravenously over 2 hours on 3 successive days. She provided milk samples at 0, 1, 2, 4, 8 and 12 hours after each dose. Breastmilk levels at 0 and 12 hours were not quantifiable (<0.06 mg/L). Peak levels occurred at 1 hour after the end of the infusion and averaged 5.3 mg/L (range 5.1 to 5.6 mg/L). By 4 hours after the dose, milk levels averaged 1.1 mg/L (range 1.0 to 1.6 mg/L) and by 8 hours, milk levels averaged 0.27 mg/L (range 0.2 to 0.37 mg/L). The authors calculated that a fully breastfed infant would have received an average of 0.19 mg/kg daily (range 0.16 to 0.21 mg/kg daily) of methylprednisolone, which is less than the lowest recommended therapeutic dose for infants. Withholding nursing for 2 to 4 hours after a dose would reduce the dose substantially.[5]

A woman who was nursing a 9-month-old infant was given intravenous methylprednisolone 1 gram daily for 3 days to treat multiple sclerosis. Cortisol milk levels were measured in breastmilk because of a lack of a methylprednisolone assay. The milk cortisol concentration was 306 mcg/L at the fourth hour after the last dose, which the authors state is approximately equal to the endogenous production of cortisol in an infant (note that normal breastmilk cortisol is less than 20 mcg/L). The authors considered that waiting 4 hours after a 1 gram dose of methylprednisolone before resuming breastfeeding to be adequate.[6]

Sixteen nursing mothers with multiple sclerosis received 1 gram of methylprednisolone intravenously over 1 hour, either monthly (n = 7) or over 3 consecutive days (n = 9).[7] Breastmilk samples were taken at 1, 2 4, 8 and 12 hours after each dose, and 2 women receiving 3 doses also provided milk samples prior to their doses. Peak milk methylprednisolone concentrations occurred 1 hour after the end of the infusion in all women and averaged 1.24 mg/L (range 0.55 to 2.1 mg/L). Subsequent average milk levels were 0.76 mg/L, 0.29 mg/L, 0.04 mg/L and 0.01 mg/L at 2, 4, 8 and 12 hours after the infusion, respectively. The average daily dosage over the 13 hours from the start of the infusion to 12 hours after the infusion was 0.047 mg/kg. No accumulation of the drug occurred in breastmilk of the mothers receiving 3 consecutive days of therapy.[7]

Twelve women with postpartum relapses of multiple sclerosis were given 1-hour infusions of methylprednisolone 1 gram daily for 3 to 5 days. Maternal blood and milk samples were obtained before and 0.5 hours after the start of the infusion, at the end of the infusion, and 1, 2, 4, 8, 12, and 24 hours after the end of the infusion. Milk methylprednisolone levels averaged 1, 2.09, 1.9, 1.17, 0.59, and 0.04 mg/L through 8 hours, respectively. Milk levels were below the quantification limit (<0.026 mg/L) before the infusion and at 12 and 24 hours after the infusion. The average milk level over 24 hours was 0.46 mg/L which resulted in an average infant dosage of 0.0695 mg/kg daily and a weight-adjusted relative infant dosage of 0.5%.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

None reported with methylprednisolone or any other corticosteroid. Three infants were breastfed from birth during maternal use of methylprednisolone 6 to 8 mg daily with no reported adverse effects up to 3 months. In one of the papers, 2 infants had normal blood cell counts, no increase in infections and above average growth rates.[3,9]

Sixteen nursing mothers with multiple sclerosis received 1 gram of methylprednisolone intravenously over 1 hour, either monthly (n = 7) or over 3 consecutive days (n = 9). Infants did not breastfeed for 4 hours after the dose. No adverse effects were observed in infants during 3 to 12 months of follow-up.[7]

A woman with rheumatoid arthritis was treated during pregnancy with methylprednisolone 8 to 16 mg daily. After delivery, she was maintained on methylprednisolone 8 mg daily plus corticosteroid (not specified) injections into her metacarpal joints while breastfeeding (extent not stated) her infant. At 9 months of age, the baby had normal growth and psychomotor development, with no clinical nor laboratory alterations. The baby received routine vaccinations with no adverse effects.[10]

Twelve infants of mothers receiving methylprednisolone 1 gram intravenously over 1 hour for 3 or 5 days were breastfed by their mothers except for the first 2 hours after the infusion. The infants averaged 8 months of age (range 1 to 16 months). The infants were normal in weight and height and had reached their milestones at the time of the study. No adverse effects were seen in the infants during a 6 to 24 month follow-up period.[8]

A mother was taking methyl prednisolone, topiramate, hydroxychloroquine, and enoxaparin. She reported that her infant of 0.1 month of age who was 25% breastfed experienced vomiting. The reaction was rated as possible or probable, but mild.[11]

### Effects on Lactation and Breastmilk

A patient who was 6 weeks postpartum and predominantly breastfeeding her infant received 24 mg of depot methylprednisolone plus 15 mg of lidocaine intralesionally for tenosynovitis of the wrist. Thirty hours after the injection, lactation ceased. Her breasts were soft and not engorged at that time. Thirty-six hours later, lactation resumed slowly, reaching normal milk production 24 hours later. The author hypothesized that the suppression might have occurred because the injection was in a highly mobile joint, which might have caused rapid release of the corticosteroid. Medium to large doses of corticosteroids given systemically or injected into joints or the breast have been reported to cause temporary reduction of lactation.[12-16]

A study of 46 women who delivered an infant before 34 weeks of gestation found that a course of another corticosteroid (betamethasone, 2 intramuscular injections of 11.4 mg of betamethasone 24 hours apart) given between 3 and 9 days before delivery resulted in delayed lactogenesis II and lower average milk volumes during the 10 days after delivery. Milk volume was not affected if the infant was delivered less than 3 days or more than 10 days after the mother received the corticosteroid.[17] An equivalent dosage regimen of methylprednisolone might have the same effect.

A study of 87 pregnant women found that betamethasone given as above during pregnancy caused a premature stimulation of lactose secretion during pregnancy. Although the increase was statistically significant, the clinical importance appears to be minimal.[18] An equivalent dosage regimen of methylprednisolone might have the same effect.

Sixteen nursing mothers with multiple sclerosis received 1 gram of methylprednisolone intravenously over 1 hour, either monthly (n = 7) or over 3 consecutive days (n = 9). None of the mothers reported a decrease in their milk supply.[13]

### Alternate Drugs to Consider

Prednisolone, Prednisone

### References

1 Drago BB, Kimura D, Rovnaghi CR, et al. Double-blind, placebo-controlled pilot randomized trial of methylprednisolone infusion in pediatric acute respiratory distress syndrome. Pediatr Crit Care Med 2015;16:e74-81.25634565
2 Huang YY, Chen MJ, Chiu NT, et al. Adjunctive oral methylprednisolone in pediatric acute pyelonephritis alleviates renal scarring. Pediatrics 2011;128:e496-504.21844061
3 Coulam CB, Moyer TP, Jiang NS, et al. Breast-feeding after renal transplantation. Transplant Proc 1982;14:605-9.6817481
4 Strijbos E, Coenradie S, Touw DJ, et al. High-dose methylprednisolone for multiple sclerosis during lactation: Concentrations in breast milk. Mult Scler 2015;21:797-8.25583837
5 Cooper SD, Felkins K, Baker TE, et al. Transfer of methylprednisolone into breast milk in a mother with multiple sclerosis. J Hum Lact 2015;31:237-9.25691380
6 Gunduz S, Gencler OS, Celik HT. Four hours is enough for lactation interruption after high-dose methylprednisolone treatment in multiple sclerosis mothers by measuring milk cortisol levels. J Matern Fetal Neonatal Med 2016;29:3495.26755401
7 Boz C, Terzi M, Zengin Karahan, S, et al. Safety of IV pulse methylprednisolone therapy during breastfeeding in patients with multiple sclerosis. Mult Scler 2018;24:1205-11.28649909
8 Zengin Karahan S, Boz C, Terzi M, et al. Methylprednisolone concentrations in breast milk and serum of patients with multiple sclerosis treated with IV pulse methylprednisolone. Clin Neurol Neurosurg 2020;197:106118.32768896
9 Grekas DM, Vasiliou SS, Lazarides AN. Immunosuppressive therapy and breast-feeding after renal transplantation. Nephron 1984;37:68.6371564
10 Costanzo G, Firinu D, Losa F, et al. Baricitinib exposure during pregnancy in rheumatoid arthritis. Ther Adv Musculoskelet Dis 2020;12:1759720X19899296.
11 Morze K, Szałek E, Waszyk-Nowaczyk M. Minding the gap. Drug-related problems among breastfeeding women. Front Pharmacol 2025;16:1542269.40183105
12 McGuire E. Sudden loss of milk supply following high-dose triamcinolone (Kenacort) injection. Breastfeed Rev 2012;20:32-4.22724311
13 Babwah TJ, Nunes P, Maharaj RG. An unexpected temporary suppression of lactation after a local corticosteroid injection for tenosynovitis. Eur J Gen Pract 2013;19:248-50.24261425
14 Smuin DM, Seidenberg PH, Sirlin EA, et al. Rare adverse events associated with corticosteroid injections: A case series and literature review. Curr Sports Med Rep 2016;15:171-6.27172081
15 Das N, Dave S, Dangaich R, et al. Lactation failure following therapeutic steroid treatment in a mother with postpartum depression and spinal-dural arteriovenous fistula: Case report and literature review. Int J Gynaecol Obstet 2024;165:389-91.38093554
16 Rosen-Carole C, Datta P, Palmiter K, et al. Transfer of injected triamcinolone into human milk of a lactating patient suffering from idiopathic granulomatous mastitis. Breastfeed Med 2023;18:74-7.36638194
17 Henderson JJ, Hartmann PE, Newnham JP, et al. Effect of preterm birth and antenatal corticosteroid treatment on lactogenesis II in women. Pediatrics 2008;121:e92-100.18166549
18 Henderson JJ, Newnham JP, Simmer K, et al. Effects of antenatal corticosteroids on urinary markers of the initiation of lactation in pregnant women. Breastfeed Med 2009;4:201-6.19772378

## Substance Identification

### Substance Name

Methylprednisolone

### CAS Registry Number

83-43-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Corticosteroids, Systemic

Glucocorticoids

Anti-Inflammatory Agents